# Ferumoxides

CASRN: 119683-68-0

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Ferumoxides is a complex of iron oxide and dextran, similar to iron dextran. It is not expected to pose a toxic risk to a nursing infant. However, because there is no published experience with ferumoxides during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Gadopentetate

## Substance Identification

### Substance Name

Ferumoxides

### CAS Registry Number

119683-68-0

### Drug Class

- Breast Feeding
- Lactation
- Contrast Media
- Diagnostic Agents